# Phenylephrine

CASRN: 59-42-7

## Drug Levels and Effects

### Summary of Use during Lactation

The oral bioavailability of phenylephrine is negligible, so the drug is unlikely to reach the infant.[1] However, intravenous or oral administration of phenylephrine might decrease milk production. An alternate drug may be preferred, especially while nursing a newborn or preterm infant.

Phenylephrine nasal spray or ophthalmic drops are less likely to decrease lactation. To substantially diminish the effect of the drug after using eye drops, place pressure over the tear duct by the corner of the eye for 1 minute or more, then remove the excess solution with an absorbent tissue.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information in humans was not found as of the revision date. However, animal data indicate that phenylephrine can decrease milk production and pseudoephedrine, a pharmacologically similar vasoconstrictor, decreases milk production in nursing mothers after oral use.[2-4]

### Alternate Drugs to Consider

Oxymetazoline

### References

1 Eccles R. Substitution of phenylephrine for pseudoephedrine as a nasal decongeststant. An illogical way to control methamphetamine abuse. Br J Clin Pharmacol 2007;63:10-4.17116124
2 Bruckmaier R, Mayer H, Schams D. Effects of alpha- and beta-adrenergic agonists in intramammary pressure and milk flow in dairy cows. J Dairy Res 1991;58:411-9.1684977
3 Inderwies T, Pfaffl MW, Bruckmaier RM. Milking characteristics and their relation to adrenergic receptor mRNA expression and ligand binding in the mammary gland of dairy cows. Domest Anim Endocrinol 2003;25:275-86.14550511
4 Aljazaf K, Hale TW, Ilett KF, et al. Pseudoephedrine: Effects on milk production in women and estimation of infant exposure via breastmilk. Br J Clin Pharmacol 2003;56:18-24.12848771

## Substance Identification

### Substance Name

Phenylephrine

### CAS Registry Number

59-42-7

### Drug Class

Breast Feeding

Lactation

Milk, Human

Adrenergic Agents

Adrenergic Alpha-Agonists

Antiglaucoma Agents

Sympathomimetics

Vasoconstrictor Agents

Nasal Decongestants